# Lemborexant

CASRN: 1369764-02-2

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of lemborexant in milk are low. If lemborexant is required by the mother, it is not a reason to discontinue breastfeeding. Until more data become available, monitor the infant for sedation, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A woman took lemborexant 10 mg, brotizolam 0.25 mg and etizolam 0.5 mg at bedtime during pregnancy and postpartum. Five colostrum samples were taken during day 2 and 3 postpartum at times ranging from 8 to 19.6 hours after a dose. Milk concentrations ranged from 1.8 to 12.7 mcg/L, with the highest concentration in the sample taken 8 hours after the dose. The estimated daily infant dose via breastmilk using the highest milk level value was 1.91 mcg/kg daily, which translates to a relative infant dose of 1.21%.[1]

A manufacturer-sponsored study was done in 8 women who had breastfed for at least 5 weeks postpartum. Each was given a single 10 mg oral dose of lemborexant, and complete extractions of breastmilk were collected by an electric breast pump in intervals up to 10 days after the dose. Over the 240-hour collection period a total of 0.0174 mg of the unchanged drug was collected in milk, 70% of which was from the first 24 hours of collection. The authors calculated that a fully breastfed infant would receive an average weight-adjusted relative infant dose of 1.96% of the mother’s dose.[2]

In a study describing a new assay method, milk samples were donated by a woman with bipolar disorder who was on long-term lemborexant therapy at a dose of 5 mg every night before sleep. Milk samples were collected “a few days” after delivery at 70 and 565 minutes after a dose. The concentrations in breastmilk were 4.69 mcg/L at 70 minutes and 5.12 mcg/L at 565 minutes after administration. The authors estimated a relative infant dose of 1.05% at 565 minutes after administration.[3,4]

Five women who were taking an average dose of 7 mg of lemborexant during pregnancy and breastfeeding were studied. The abstract did not report milk sample collection methods, but stated that the median milk level of lemborexant was 4.50 mcg/L (IQR, 3.34 to 14.45 mcg/L), resulting in a median RID of 0.89% (IQR, 0.65% to 1.37%).[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Five women who were taking an average dose of 7 mg of lemborexant during pregnancy and breastfeeding were studied. No neonatal abstinence syndrome or neurological complications were observed in their neonates up to 1 month after delivery.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Saito J, Ishii M, Sandaiji N, et al. Lemborexant levels in maternal serum, cord blood, and breast milk during pregnancy and lactation: A case report. Psychiatry Clin Neurosci Rep 2023;2:e62.38868416
2 Rawal S, Brimhall D, Aluri J, et al. Lemborexant levels in breast milk after single doses in healthy, lactating women. Br J Clin Pharmacol 2024;90:158–63.37565541
3 Ishikawa H, Furugen A, Nishimura A, et al. Validated UPLC-MS/MS method for quantification of melatonin receptor agonists and dual orexin receptor antagonists in human plasma and breast milk: Application to quantify suvorexant and lemborexant in clinical samples. J Pharm Biomed Anal 2024;251:116432.39180895
4 Furugen A. Safety assessment of medications during pregnancy and breastfeeding based on quantitative and toxicological analyses. Biol Pharm Bull 2025;48:337–43.40175155
5 Ozawa S, Sakaue S, Fuseya C, et al. Placental and lactational transfer of lemborexant in perinatal women and their associations with neonatal health. Eur J Clin Pharmacol 2025;81:P311. doi:10.1007/s00228-025-03859-x

## Substance Identification

### Substance Name

Lemborexant

### CAS Registry Number

1369764-02-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Orexin Receptor Antagonists

Sleep Aids, Pharmaceutical